# Fenoprofen

CASRN: 31879-05-7

## Drug Levels and Effects

### Summary of Use during Lactation

Some reviewers consider fenoprofen to be acceptable during breastfeeding.[1] Because there is little published experience with fenoprofen during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date. Data are limited to those reported in a review article by the drug’s manufacturer in which no study details are reported. After a dose of 600 mg every 6 hours for 4 days in postpartum mothers, breastmilk fenoprofen levels were reportedly 1.6% of those in maternal plasma and below those accurately detected by the assay (assay limit not stated).[2] Additionally, fenoprofen has glucuronide metabolites that could be absorbed as fenoprofen by a newborn.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Brooks PM, Needs CJ. Antirheumatic drugs in pregnancy and lactation. Baillieres Clin Rheumatol 1990;4:157–71.2282661
2 Rubin A, Chernish SM, Crabtree R, . A profile of the physiological disposition and gastro-intestinal effects of fenoprofen in man. Curr Med Res Opin 1974;2:529–44.4615886

## Substance Identification

### Substance Name

Fenoprofen

### CAS Registry Number

31879-05-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal